# Segesterone Acetate

CASRN: 7759-35-5

## Drug Levels and Effects

### Summary of Use during Lactation

In the United States, segesterone is available only as an estrogen-containing vaginal ring. Based on the available evidence, expert opinion in the United States holds that postpartum women who are breastfeeding should not use combined hormonal contraceptives during the first 3 weeks after delivery because of concerns about increased risk for venous thromboembolism and generally should not use combined hormonal contraceptives during the fourth week postpartum because of concerns about potential effects on breastfeeding performance. Postpartum breastfeeding women with other risk factors for venous thromboembolism generally should not use combined hormonal contraceptives until 6 weeks after delivery.[1] World Health Organization guidelines are more restrictive, stating that combined oral contraceptives should not be used in nursing mothers before 42 days postpartum and the disadvantages of using the method generally outweigh the advantages between 6 weeks and 6 months postpartum.[2] A decrease in milk supply can happen over the first few days of estrogen exposure.[3]

### Drug Levels

Maternal Levels. Six postpartum women who were breastfeeding their infants were given subdermal implants containing 20 mg of segesterone acetate. Paired milk and plasma samples were obtained at about 2 weeks after insertion and at 10-day intervals for up to 2 additional times. Among 13 milk samples, the mean segesterone concentration was 37.5 ng/L (range 7 to 73 ng/L).[4]

Sixty-six postpartum women who were fully breastfeeding their infants were given subdermal implants containing 50 mg of segesterone acetate. A breastmilk sample was obtained at 75 days post-insertion from 24 of the women. The average milk level was 138 ng/L (range 73 to 237 ng/L).[5]

One hundred postpartum women who were fully breastfeeding their infants were given subdermal implants containing 80 mg of segesterone acetate at 55 to 60 days postpartum. The implants released about 100 mcg of segesterone acetate daily. Breastmilk samples were obtained from 14 of the women once weekly for the first month after implant insertion, then every 2 weeks until weaning. Milk segesterone levels ranged from 20 to 50 ng/L. The authors estimated that the dose transferred to the infant, assuming a daily intake of 800 mL of milk, was about 50 ng daily in the first month after insertion, decreasing to around 20 ng daily thereafter.[6]

Infant Levels. Sixty-six postpartum women who were fully breastfeeding their infants were given subdermal implants containing 50 mg of segesterone acetate. An infant blood sample was obtained at 75 days post-insertion from 25 of the infants. The average infant serum level was 7 ng/L (range <5 to 20 ng/L).[5]

### Effects in Breastfed Infants

Relevant published information on segesterone acetate and ethinyl estradiol vaginal insert was not found as of the revision date. Studies on the use of segesterone acetate implants have found no adverse effects on growth and development.[5,6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Etonogestrel, Intrauterine Copper Contraceptive, Oral Levonorgestrel, Intrauterine Levonorgestrel, Levonorgestrel Implant, Medroxyprogesterone Acetate, Norethindrone, Progesterone

### References

1 Nguyen AT, Curtis KM, Tepper NK, et al. U.S. Medical Eligibility Criteria for Contraceptive Use, 2024. MMWR Recomm Rep 2024;73:1–126.39106314
2 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Sixth Ed. 2025. https://www.who.int/publications/i/item/9789240115583
3 Moses-Kolko EL, Berga SL, Kalro B, et al. Transdermal estradiol for postpartum depression: A promising treatment option. Clin Obstet Gynecol 2009;52:516–29.19661765
4 Lähteenmäki PL, Díaz S, Miranda P, et al. Milk and plasma concentrations of the progestin ST-1435 in women treated parenterally with ST-1435. Contraception 1990;42:555–62.2272183
5 Coutinho EM, Athayde C, Dantas C, et al. Use of a single implant of elcometrine (ST-1435), a nonorally active progestin, as a long acting contraceptive for postpartum nursing women. Contraception 1999;59:115–22.10361626
6 Massai MR, Díaz S, Quinteros E, et al. Contraceptive efficacy and clinical performance of Nestorone implants in postpartum women. Contraception 2001;64:369–76.11834236

## Substance Identification

### Substance Name

Segesterone Acetate

### CAS Registry Number

7759-35-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents, Female